# Benzoyl Peroxide

CASRN: 94-36-0

## Drug Levels and Effects

### Summary of Use during Lactation

Topical benzoyl peroxide has not been studied during breastfeeding. Because only about 5% is absorbed following topical application, it is considered a low risk to the nursing infant.[1,2] Ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Acne) Azelaic Acid, Clindamycin, Erythromycin, Tretinoin

### References

1 Leachman SA, Reed BR. The use of dermatologic drugs in pregnancy and lactation. Dermatol Clin 2006;24:167-97.16677965
2 Zip C. Common sense dermatological drug suggestions for women who are breast-feeding. Skin Therapy Lett 2002;7:5-7.12007012
3 Noti A, Grob K, Biedermann M, et al. Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol 2003;38:317-25.14623482

## Substance Identification

### Substance Name

Benzoyl Peroxide

### CAS Registry Number

94-36-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents

Peroxides